# Mebendazole

CASRN: 31431-39-7

## Drug Levels and Effects

### Summary of Use during Lactation

Mebendazole is poorly excreted into breastmilk and poorly absorbed orally. Reports on the use of mebendazole during breastfeeding have found no adverse reactions in breastfed infants. There are rare case reports of a decrease in milk supply following use of mebendazole, but no convincing evidence that these were caused by the drug. No special precautions are required.

### Drug Levels

Maternal Levels. One author reported information received by personal communication from the manufacturer stating that after a single 100 mg oral dose of mebendazole to a nursing mother (time postpartum not stated), the peak milk level was 6 mcg/L. Mebendazole was no longer detectable (<1 mcg/L) in milk 13.25 hours after the dose.[1]

One woman was given mebendazole 100 mg orally twice daily for 3 days beginning the first day postpartum. Mebendazole was measured in milk following treatment (exact timing not stated). Mebendazole was undetectable (<20 mcg/L) in milk. The authors stated that this value was in agreement with those reported by the manufacturer and that the infant probably absorbed negligible mebendazole from breastmilk.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A case series reported 45 nursing mothers who took mebendazole in doses ranging from 100 mg once to 200 mg twice daily for 3 days. About half took 100 mg repeated once after 7 to 14 days. Thirty-three of the infants were exclusively breastfed with ages ranging from 1 to 30 weeks of age. Eight of the 12 partially breastfed infants were over 20 weeks of age. None of the infants were reported by their mothers to have had any adverse reactions.[3]

A cohort of 33 infants who were breastfed (extent not stated) by hospitalized mothers taking nifurtimox was followed in the Democratic Republic of the Congo. Thirty mothers took a full course of 30 doses of oral nifurtimox 15 mg/kg daily and all received 14 doses of intravenous eflornithine 400 mg/kg daily for 7 days for human African trypanosomiasis. (sleeping sickness). Seventeen nursing mothers also took mebendazole. No serious adverse events were reported in any of the breastfed infants.[4,5]

### Effects on Lactation and Breastmilk

A nursing mother who was 13 weeks postpartum was taking oral metronidazole 250 mg three times daily. Milk production seemed to be unaffected. On the eighth day of therapy she passed a roundworm. Metronidazole was discontinued and oral mebendazole 100 mg twice daily was started. The patient was "tense" for a few days after passing the worm. On the second day of mebendazole treatment, milk production dropped markedly and she began supplementation with formula. By day 7, milk production had ceased. The authors suggested that mebendazole might have caused the drop in milk production, but offered no further evidence other than the temporal relationship.[6]

Four patients were treated with oral mebendazole 100 mg twice daily for 3 days beginning the first day postpartum. Two had pinworm (Enterobius), 1 had roundworm (Ascaris) and 1 had hookworm (Ancyclostomia) infestations. All breastfed successfully.[2]

One author reported information received by personal communication from the manufacturer stating that no inhibition of lactation was noted after a single 100 mg oral dose of mebendazole to a nursing mother (time postpartum not stated).[1]

In a case series reported 45 nursing mothers who took mebendazole in doses ranging from 100 mg once to 200 mg twice daily for 3 days, one mother reported a slight decrease in milk production.[3]

### Alternate Drugs to Consider

Albendazole

### References

1 Stoukides C. Can a mother safely breastfeed while on mebendazole (Vermox)? J Hum Lact 1994;10:269.7619284
2 Kurzel RB, Toot PJ, Lambert LV, et al. Mebendazole and postpartum lactation. N Z Med J 1994;107:439.7970347
3 Karra N, Cohen R, Berlin M, et al. Safety of mebendazole use during lactation: A case series report. Drugs R D 2016;16:251-4.27623793
4 Schmid C, Kuemmerle A, Blum J, et al. In-hospital safety in field conditions of nifurtimox eflornithine combination therapy (NECT) for T. b. gambiense sleeping sickness. PLoS Negl Trop Dis 2012;6:e1920.23209861
5 Kuemmerle A, Schmid C, Kande V, et al. Prescription of concomitant medications in patients treated with nifurtimox eflornithine combination therapy (NECT) for T.b. gambiense second stage sleeping sickness in the Democratic Republic of the Congo. PLoS Negl Trop Dis 2020;14:e0008028.31986140
6 Rao TS. Does mebendazole inhibit lactation? N Z Med J 1983;96:589-90.6575310

## Substance Identification

### Substance Name

Mebendazole

### CAS Registry Number

31431-39-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Antinematodal Agents